# Atrasentan

CASRN: 173937-91-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of atrasentan during breastfeeding. The manufacturer recommends that breastfeeding be discontinued during atrasentan therapy because of potential adverse effects in the infant such as hypotension.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Atrasentan

### CAS Registry Number

173937-91-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Endothelin Receptor Antagonists